# Methenamine Mandelate

CASRN: 587-23-5

## Drug Levels and Effects

### Summary of Use during Lactation

Both methenamine and mandelic acid pass into milk in small quantities. Methenamine mandelate appears acceptable to use, even while nursing a newborn.

### Drug Levels

Maternal Levels. Six mothers nursing newborn infants were given methenamine hippurate 1 gram orally. Five hours after the dose, a mean methenamine concentration of 7 mg/L was found in milk. In two other women, milk concentrations averaged 9.1 mg/L at 2 to 3 hours after a 1 gram dose of methenamine hippurate orally and 4.3 mg/L at 6 to 7 hours after the dose. Based on the amount of milk ingested, the authors calculated the dose the infants received to be 0.05 to 0.1 mg/kg, which is about 1% of the adult dose.[1]

Six mothers were given mandelic acid 3 grams orally 4 times daily, a dose far in excess of that contained in a typical dose of methenamine mandelate. The authors estimated that their exclusively breastfed infants received an average 273 mg of mandelic acid daily in breastmilk. This amounted to an average daily dosage of 86 mg/kg in the 6 infants, which is about 48% of the adult dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four newborn infants were allowed to breastfeed in one study after a maternal dose of 1 gram of methenamine hippurate. No adverse effects were reported.[1]

Six infants were allowed to nurse during maternal ingestion of the large daily dosage of 12 grams of mandelic acid. There was no clinical or laboratory evidence of harm to the infants.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methenamine Hippurate

### References

1 Allgén LG, Holmberg G, Persson B, et al. (1979). Biological fate of methenamine in man. Acta Obstet Gynecol Scand.
2 Berger H. (1941). Excretion of mandelic acid in breast milk. Am J Dis Child.

## Substance Identification

### Substance Name

Methenamine Mandelate

### CAS Registry Number

587-23-5

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents, Urinary

Antibacterial Agents